# Lysine

CASRN: 56-87-1

## Drug Levels and Effects

### Summary of Use during Lactation

Lysine is an indispensable (essential) amino acid that is normally present in breastmilk. The recommended dietary allowance for nursing mothers for lysine is 52 mg/kg daily or 3.6 grams daily for a 70 kg person.[1] No information is available on the use of high-dose lysine supplementation during breastfeeding, such as for Herpes infection. There is no correlation between dietary intake of lysine and milk lysine content,[2] so oral lysine supplementation might not markedy increase the amount of lysine in milk. Caution is warranted in using any single amino acid at a level significantly above that normally found in food,[1] but lysine supplements are probably a low risk during breastfeeding. An alternate drug may be preferred while nursing a newborn or preterm infant.

### Drug Levels

The dietary reference intake (DRI) for infants up to 6 months of age is 640 mg or 107 mg/kg daily of lysine.[1]

Maternal Levels. The total lysine content of milk averages 915 mg/L in the first month postpartum and decreases to an average of 622 mg/L in month 6 postpartum.[3] Mature milk is considered to contain an average of about 755 mg/L of lysine.[4] No information is available on levels after the use of lysine supplements.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Herpes simplex) Acyclovir, Penciclovir, Valacyclovir

### References

1 Institute of Medicine. 2006. Dietary Reference Intakes: The essential guide to nutrient requirements. Washington, DC: The National Academies Press. 10.17226/11537. 2006.
2 Juncker H, Wang P, Petersohn I, . Maternal dietary protein and amino acid intake is not associated with the amino acid composition of human milk in an affluent environment. Br J Nutr 2024;132:590–8.39308211
3 van Sadelhoff J, van de Heijning B, Stahl B, . Longitudinal variation of amino acid levels in human milk and their associations with infant gender. Nutrients 2018;10:1233.30189593
4 Moughan P, Deglaire A, Yan Y, . Amino acid requirements of the infant: the amino acid composition of human breast milk. Front Nutr 2024;11:1446565.39355558

## Substance Identification

### Substance Name

Lysine

### CAS Registry Number

56-87-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Amino Acids